# Zavegepant

CASRN: 1337918-83-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of zavegepant in breastmilk after intranasal administration, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. Twelve healthy lactating women who were at least 2 weeks postpartum were give a single intranasal dose of 10 mg of zavegepant. Milk samples were taken before the dose and at 0 to 2, 2 to 4, 4 to 6, 6 to 8, 8 to 12, 12 to 16, and 16 to 24 hours after the dose. The median peak milk concentration was 1.10 mcg/L, and the geometric mean peak concentration was 0.77 mcg/L at a median of 4.83 hours after the dose. The estimated infant daily dosage was 0.05 to 0.06 mcg/kg, which resulted in an RID of 0.04 to 0.05%.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Migraine Prophylaxis) Divalproex, Erenumab, Metoprolol, Nortriptyline, Propranolol, Topiramate, Valproic Acid; (Migraine Treatment) Eletriptan, Rimegepant, Rizatriptan, Sumatriptan, Ubrogepant, Zolmitriptan

### References

1 Jakate A, Weng Y, Shkrodova A, et al. A phase 1 study of the breast milk and plasma pharmacokinetics of zavegepant 10 mg intranasal dose in healthy lactating women. Headache 2026;66:1050–7.41502343

## Substance Identification

### Substance Name

Zavegepant

### CAS Registry Number

1337918-83-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics

Calcitonin Gene-Related Peptide Receptor Antagonists

CGRP-R Inhibitors